# Pegvisomant

CASRN: 218620-50-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that pegvisomant is poorly excreted into breastmilk. Because pegvisomant is not orally absorbed, it is unlikely to adversely affect the breastfed infant. Polyethylene glycol is not excreted into breastmilk.[1]

### Drug Levels

Maternal Levels. A woman was being treated during pregnancy for acromegaly with subcutaneous pegvisomant at a dosage that was progressively escalated from 15 mg to 25 mg daily during the course of pregnancy, and presumably postpartum. At an unreported time postpartum, pegvisomant was not detectable (<50 mcg/L) in breastmilk. The patient’s breastmilk growth hormone concentration was 0.6 mcg/L compared to <0.1 mcg/L in 3 breastmilk samples from normal healthy mothers.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with acromegaly was treated with lanreotide Autogel 120 mg monthly, cabergoline 2 mg weekly and pegvisomant 80 mg weekly. She breastfed (extent not stated) her infant and they were followed for 12 years. Her child had normal growth and development.[3]

### Effects on Lactation and Breastmilk

A woman with acromegaly was treated with pegvisomant 10 mg postpartum. She successfully breastfed her infant for 4 months.[4]

A woman with acromegaly was treated with lanreotide Autogel 120 mg monthly, cabergoline 2 mg weekly and pegvisomant 80 mg weekly. She breastfed (extent not stated) her infant and they were followed for 12 years.[3]

### References

1 Clowse ME, Förger F, Hwang C, . Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6.28814432
2 Brian SR, Bidlingmaier M, Wajnrajch MP, . Treatment of acromegaly with pegvisomant during pregnancy: Maternal and fetal effects. J Clin Endocrinol Metab 2007;92:3374-7.17595256
3 Popescu AD, Carsote M, Valea A, . Approach of acromegaly during pregnancy. Diagnostics (Basel) 2022;12:2669.36359512
4 Cheng S, Grasso L, Martinez-Orozco JA, . Pregnancy in acromegaly: Experience from two referral centers and systematic review of the literature. Clin Endocrinol (Oxf) 2012;76:264-71.21777265

## Substance Identification

### Substance Name

Pegvisomant

### CAS Registry Number

218620-50-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Human Growth Hormone Analogues and Derivatives

Growth Hormone Receptor Antagonists